# Lisdexamfetamine

CASRN: 608137-32-2

## Drug Levels and Effects

### Summary of Use during Lactation

Lisdexamfetamine is a prodrug of dextroamphetamine. In dosages prescribed for medical indications, some evidence indicates that dextroamphetamine might not affect nursing infants adversely. The effect of dextroamphetamine in milk on the neurological development of the infant has not been well studied. It is possible that large dosages of dextroamphetamine might interfere with milk production, especially in women whose lactation is not well established. Although most manufacturers advise that mothers not breastfeed while taking amphetamine, some experts state that therapeutic dosages of amphetamine can be used during nursing with monitoring of the infant for irritability, insomnia, and feeding difficulty.[1] Breastfeeding is generally discouraged in mothers who are actively abusing amphetamines.[2-4]

### Drug Levels

Maternal Levels. Four mothers averaging 5.5 months postpartum (range 3.3 to 10 months)were taking dextroamphetamine in an average dosage of 18 mg daily (range 15 to 45 mg daily in 2 to 4 divided doses) for attention deficit hyperactivity disorder. The median milk level was 219 mcg/L (range 66 to 313 mcg/L) which resulted in an infant dosage of 21 mcg/kg (range 11 to 39 mcg/kg) daily or 5.7% (range 4 to 10.6%) of the maternal weight-adjusted dosage.[5]

Infant Levels. Dextroamphetamine blood levels were measured in 3 breastfed infants. The mothers of these 3 infants were taking an average of 392 mcg/kg daily of dextroamphetamine. Blood levels in 2 infants were 2 and 18 mcg/L, corresponding to 6 and 14% of the maternal plasma level. The plasma level of the third infant was <1 mcg/L. The times of blood collection were not stated.[5]

### Effects in Breastfed Infants

The author of a 1973 newsletter reported a personal communication from the drug manufacturer which stated that of 103 nursing mothers treated with dextroamphetamine (dosage unspecified) for postpartum depression, no infant showed any evidence of stimulation or insomnia.[6]

Four mothers averaging 5.5 months postpartum (range 3.3 to 10 months) were taking dextroamphetamine in an average dosage of 18 mg daily (range 15 to 45 mg daily in 2 to 4 divided doses) for attention deficit hyperactivity disorder. Their infants had been breastfed (extent not stated) since birth. The infants all had weights between the 10th and 75th percentiles for their age, normal progress, and no adverse effects according to their pediatricians. Denver developmental ages for 2 of the infants were 100% and 117% of normal.[5]

In a prospective study, lactating women taking either lisdexamfetamine (Vyvanse®, Shire; n = 6) or mixed racemic amphetamine salts (n = 7) for attention deficit hyperactivity disorder were followed by telephone for several months to 5 years. Seven had also taken one of the drugs during pregnancy. At an average age of follow-up of 18 months, 5 of their 13 infants (5 fully breastfed) had experienced an adverse reaction possibly related to amphetamine in milk; 1 infant had somnolence, 3 had crying or restlessness, and 4 had colic or constipation. Four of these 5 were only partially breastfed from birth onward. All infants had normal Denver developmental scale and pediatric quality of life scores. The authors concluded that therapeutic used of amphetamines is likely compatible with breastfeeding.[7]

A retrospective Swedish study of 17 breastfed infants whose mothers were taking lisdexamfetamine measured weight gain, sleep and feeding problems, pulse and blood pressure. Eight of the infants did not regain their birthweight at 14 days of age, possibly because of exposure in utero. All infants eventually had normal growth. Sleep difficulties were seen in two infant and colic in two infants.[8]

### Effects on Lactation and Breastmilk

In 2 papers by the same authors, 20 women with normal physiologic hyperprolactinemia were studied on days 2 or 3 postpartum. Eight received dextroamphetamine 7.5 mg intravenously, 6 received 15 mg intravenously and 6 who served as controls received intravenous saline. The 7.5 mg dose reduced serum prolactin by 25 to 32% compared to control, but the difference was not statistically significant. The 15 mg dose significantly decreased serum prolactin by 30 to 37% at times after the infusion. No assessment of milk production was presented.[9,10] The authors also quoted data from another study showing that a 20 mg oral dose of dextroamphetamine produced a sustained suppression of serum prolactin by 40% in postpartum women. The maternal prolactin level in a mother with established lactation may not affect her ability to breastfeed.

In a retrospective Australian study, mothers who used intravenous amphetamines during pregnancy were less likely to be breastfeeding their newborn infants at discharge than mothers who abused other drugs (27% vs 42%). The cause of this difference was not determined.[11]

A woman with a history of ADHD, obsessive compulsive disorder, major depressive disorder, generalized anxiety disorder, and panic attacks took lisdexamfetamine 40 mg, labetalol 300 mg, and aspirin 81 mg daily during pregnancy. Her infant was born at 33 weeks and admitted to the NICU with cleft palate and micrognathia. She breastfed (extent not stated) while taking lisdexamfetamine, with no reported concerns to the infant. She stated that she had not noticed any side effects in the baby, such as increased jitteriness or sleep changes.[12]

### Alternate Drugs to Consider

(ADHD) Amphetamine, Dextroamphetamine, Methylphenidate; (Narcolepsy) Amphetamine, Armodafinil, Dextroamphetamine, Methylphenidate, Modafinil, Oxybate Salts, Pitolisant

### References

1 Scoten O, Tabi K, Paquette V, et al. Attention-deficit/hyperactivity disorder in pregnancy and the postpartum period. Am J Obstet Gynecol 2024;231:19–35.38432409
2 Oei JL, Kingsbury A, Dhawan A, et al. Amphetamines, the pregnant woman and her children: A review. J Perinatol 2012;32:737–47.22652562
3 AAP Section on Breastfeeding. Breastfeeding and the use of human milk. Pediatrics 2012;129:e827–41.22371471
4 Wong S, Ordean A, Kahan M. SOGC clinical practice guidelines: Substance use in pregnancy: No. 256, April 2011. Int J Gynaecol Obstet 2011;114:190–202.21870360
5 Wang BP, Li QL, Hu YF. Impact of epidural anesthesia during delivery on breast feeding. Di Yi Jun Yi Da Xue Xue Bao 2005;25:114–5, 8.
6 Ayd FJ. Excretion of psychotropic drugs in human breast milk. Int Drug Ther Newsl 1973;8:33–40.
7 Benassayag Kaduri N, Hazan A, De-Haan T, et al. Amphetamine use for attention deficit hyperactive disorder during breastfeeding and children's neurodevelopmental outcomes: A pilot study. Psychiatry Res 2024;339:116047.38908263
8 Alvarez I, Honkaniemi E, Svedenkrans J, et al. Lisdexamfetamine use during lactation-clinical follow-up of 17 exposed infants. Neurotoxicol Teratol 2025;109 (Suppl 2):15. doi:10.1016/j.ntt.2025.107515
9 DeLeo V, Cella SG, Camanni F, et al. Prolactin lowering effect of amphetamine in normoprolactinemic subjects and in physiological and pathological hyperprolactinemia. Horm Metab Res 1983;15:439–43.6642414
10 Petraglia F, De Leo V, Sardelli S, et al. Prolactin changes after administration of agonist and antagonist dopaminergic drugs in puerperal women. Gynecol Obstet Invest 1987;23:103–9.3583091
11 Oei J, Abdel-Latif ME, Clark R, et al. Short-term outcomes of mothers and infants exposed to antenatal amphetamines. Arch Dis Child Fetal Neonatal Ed 2010;95:F36–F41.19679891
12 Tran TH, Beal ML, Free MF, et al. To use or not use lisdexamfetamine in pregnancy and breastfeeding: a case report highlighting ADHD management and maternal-fetal outcomes. Ther Adv Reprod Health 2026;20:26334941261438664.41948521

## Substance Identification

### Substance Name

Lisdexamfetamine

### CAS Registry Number

608137-32-2

### Drug Class

Breast Feeding

Lactation

Milk, Human

Adrenergic Agents

Central Nervous System Stimulants

Dopamine Agents

Sympathomimetics

Wakefulness-Promoting Agents